# Sibutramine

CASRN: 106650-56-0

## Drug Levels and Effects

### Summary of Use during Lactation

Sibutramine is no longer marketed in the United States. Because there is no published experience with sibutramine during breastfeeding, an alternate therapy may be preferred, especially while nursing a newborn or preterm infant. Information on the effect of sibutramine on serum prolactin is somewhat conflicting.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a study of hypocaloric diet plus sibutramine in overweight and obese patients with polycystic ovary syndrome, no change was seen in serum prolactin levels over the 6-month study period.[1]

A woman developed amenorrhea-galactorrhea syndrome shortly after starting therapy with sibutramine for weight loss. Her serum prolactin was elevated, but returned to normal within 15 days of discontinuing sibutramine. It remained in the normal range during the 180-day follow-up period.[2]

The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Florakis D, Diamanti-Kandarakis E, Katsikis I, et al. (2008). Effect of hypocaloric diet plus sibutramine treatment on hormonal and metabolic features in overweight and obese women with polycystic ovary syndrome: A randomized, 24-week study. Int J Obes (Lond).
2 Soares Leaes CG, Pereira-Lima JF, da Costa Oliveira M. (2011). A case of sibutramine-induced hyperprolactinemia. Neuro Endocrinol Lett.

## Substance Identification

### Substance Name

Sibutramine

### CAS Registry Number

106650-56-0

### Drug Class

Breast Feeding

Lactation

Appetite Depressants

Anti-Obesity Agents